# Quinapril

CASRN: 85441-61-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of quinapril in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Quinapril is an inactive drug that is metabolized to the active metabolite quinaprilat. Quinaprilat is poorly absorbed orally.

Maternal Levels. Six women who had been breastfeeding their infants for at least 2 weeks and were 4 to 9 months postpartum were given a single oral dose of 20 mg of quinapril. Quinapril milk levels were detectable at 4 hours after the dose, but undetectable (<5 mcg/L) in all samples by 6 hours after the dose. Quinalaprilat milk levels were undetectable (<5 mcg/L) at all time points. The authors estimated that a breastfed infant would receive about 1.6% of the maternal weight-adjusted dosage of quinapril.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Valsartan

### References

1 Begg EJ, Robson RA, Gardiner SJ, et al. Quinapril and its metabolite quinaprilat in human milk. Br J Clin Pharmacol 2001;51:478-81 11422007

## Substance Identification

### Substance Name

Quinapril

### CAS Registry Number

85441-61-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin-Converting Enzyme Inhibitors

ACE Inhibitors

ACEIs